# Retapamulin

CASRN: 224452-66-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of retapamulin during breastfeeding. Because retapamulin is poorly absorbed after topical application, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants after maternal application away from the breast. Only water-miscible cream or gel products should be applied to the breast, because ointments may expose the infant to high levels of mineral paraffins via licking.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.

## Substance Identification

### Substance Name

Retapamulin

### CAS Registry Number

224452-66-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local

Anti-Bacterial Agents